# Rabies Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and several health professional organizations state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to rabies vaccine. Breastfed infants should be vaccinated according to the routine recommended schedules.[1,2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[1,3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
3 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478

## Substance Identification

### Substance Name

Rabies Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines